# Methylergonovine

CASRN: 113-42-8

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that maternal doses of methylergonovine up to 0.75 mg daily produce low levels in milk. Product labeling in the U.S. currently recommends avoiding breastfeeding for at least 12 hours following the last dose of methylergonovine and discarding the milk. This warning appears to be based on unpublished adverse reactions in breastfed infants after several days of maternal methylergonovine therapy. The use of shorter courses of the drug after delivery during the colostral phase of lactation are not expected to transfer appreciable amounts of drug to the breastfed infant or cause adverse effects in the infant. The lack of infant side effects was documented in one case-control study. If adverse reactions in the breastfed infant are seen, such as tachycardia, vomiting, diarrhea or agitation, the drug should be discontinued.

Although results of several imperfect studies are somewhat mixed, it appears that methylergonovine can decrease serum prolactin and possibly the amount of milk production and duration of lactation, especially when used for several days during the immediate postpartum period. The effect seems to be related to the dosage and route of administration, with injected doses having a greater impact than oral. A short course immediately postpartum does not appear to have a detrimental effect on lactation.

### Drug Levels

Maternal Levels. After a regimen of oral methylergonovine 0.125 mg 3 times daily for 5 days, a single oral dose of 0.25 mg was given to 8 women. Milk levels 1 hour after the dose ranged from undetectable in 4 women (<0.5 mcg/L) to 1.3 mcg/L. By 8 hours after the dose, 7 women had undetectable milk levels, although it was 1.2 mcg/L in one individual. The authors estimated that the maximum dosage a breastfed infant would receive after a 7.5 mg daily maternal dosage would be 1.3 mcg which is about 0.3% of the adult dosage.[1]

Methylergonovine maleate 0.75 mg daily was administered to postpartum women for 4 days. The exact dosage regimen and number of women were not reported. Two hours after the last dose, milk samples contained 1.3 mcg/L of methylergonovine.[2]

Ten women who averaged 4.8 days postpartum received a single oral dose of methylergonovine 250 mcg. Milk samples were obtained from one breast from 0.5 to 5 hours after the dose. Average milk levels were 368 ng/L and 527 ng/L at 1 and 2 hours after the dose, respectively. The mean peak milk level was 657 ng/L (range 410-830 ng/L), at 1.8 hours after the dose. In 2 women, the peak milk level occurred 3 hours after the dose. By 5 hours, the average milk level was 200 ng/L. The half-life in breastmilk averaged 2.3 hours.[3]

Twelve mothers were treated with methylergonovine 0.125 mg three times daily for 5 days to treat incomplete postpartum uterine involution. The mothers collected eleven 3 mL samples of milk after an oral dose of 0.125 mg of methylergonovine over the following 12 hours. The average peak milk level was 437 ng/L at 2 hours after the dose. Milk levels fell to an average of 86 ng/L at 5 hours after the dose and were undetectable (<50 ng/L) at 6 hours and thereafter.[4]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

According to the manufacturer, there are isolated reports of adverse effects in breastfed infants whose mothers were receiving methylergonovine for several days. One or more of the following symptoms were observed during methylergonovine therapy and disappeared upon withdrawal of the medication: elevated blood pressure, bradycardia, tachycardia, vomiting, diarrhea, restlessness, or clonic cramps. Another case reported to the manufacturer was a breast-fed infant who presented with seizures after about 4 to 6 days of maternal methylergonovine therapy. The infant’s seizures began on the second day of treatment of the mother after breastfeeding. Medications were discontinued per the mother. The infantile seizures resolved about six weeks later.[5] It is not possible to determine the causality of any of the adverse effects with the information available.

A working group of the French national medication safety agency (ANSM) reported 23 cases of infants exposed to methylergonovine via breastmilk who had a total of 44 adverse reactions. (Some of these might be the same as those reported in the preceding paragraph.) The working group considered tachycardia, vomiting, diarrhea and agitation to be sufficiently well documented to add to the prescribing information.[6]

A prospective case-control study compared the outcome of infants whose mothers had taken methylergonovine postpartum 0.125 mg 2 times daily for 5 days or 3 times daily for 3 days to mothers who had taken amoxicillin which served as a control group. Of 29 mothers who had taken methylergonovine, there were no differences in neonatal health or development at follow-up at 17 months postpartum between the treatment and control groups.[7]

### Effects on Lactation and Breastmilk

Oral methylergonovine in a dose of 0.2 mg 3 times daily for 7 days in 10 postpartum subjects caused no difference in serum prolactin concentrations from placebo administered to 10 postpartum control women. No significant difference found in the daily milk volumes between the groups.[8]

A single intramuscular injection of methylergonovine 0.2 mg given to 4 women on day 3 postpartum caused a decrease in serum prolactin beginning 45 to 60 minutes after the dose. For 2 to 3 hours after the dose, serum prolactin levels remained about 50% lower than baseline levels.[9]

A single intramuscular injection of methylergonovine 0.2 mg was given to 14 women during the first 1.5 hours postpartum. At 80 to 90 minutes after the injection, the normal postpartum rise in serum prolactin was 56% in the women who received methylergonovine compared to a 285% in serum prolactin in women who received a placebo injection. Six treated women had no increase in serum prolactin compared to 2 of the control women.[10]

Thirty women who delivered fullterm infants received a single intramuscular dose of methylergonovine 0.2 mg after delivery, followed by oral ergotamine 1 mg 3 times daily for 6 days. Compared to 28 women who delivered fullterm infants and received no ergot derivatives, there was no difference in the milk production, as measured by weight differences before and after nursing, between the 2 groups during the first 6 days postpartum.[11]

Thirty postpartum women were given methylergonovine 0.2 mg orally 3 times daily for the first 7 days postpartum. Baseline (prior to nursing) serum prolactin was no different from those of 30 postpartum women who received no methylergonovine on days 1 and 3 postpartum. However, on day 7 postpartum, serum prolactin levels were significantly less in the treated women. Milk production was also reduced in the treated women on days 3 and 7 postpartum compared to controls.[12]

Ten women received a single intravenous dose of 0.4 mg of methylergonovine immediately postpartum were compared to 10 control mothers who received no methylergonovine; all women received a continuous infusion of oxytocin postpartum. None of the women were allowed to nurse or extract milk from their breasts or to receive hormones to suppress lactation. Serum prolactin measured during labor, immediately after administration of the drug and daily at 9 am for 5 days postpartum found no statistical differences in prolactin levels between the 2 groups.[13]

In a randomized study, 48 patients were given methylergonovine 0.125 mg orally every 8 hours for the first 7 days postpartum. Another 44 in the same hospital were not given methylergonovine. No statistical differences were found in the serum levels of prolactin at 3 days postpartum between the groups, although women with normal deliveries had higher prolactin levels than those delivered by cesarean section. At 1 month postpartum, no differences were found in the percentage of exclusive breastfeeding or in the weight gain of infants.[14]

In a prospective, randomized study, 444 postpartum mothers were given 0.125 mg of methylergonovine 3 times a day, while 436 were given placebo. Milk production among untreated women averaged 880 grams during the first 6 days, while among treated patients it was only 563 grams. After 4 weeks there were still differences in the quantity of milk produced.[15]

A prospective case-control study compared lactation in mothers who had taken methylergonovine postpartum 0.125 mg 2 times daily for 5 days or 3 times daily for 3 days to mothers who had taken amoxicillin which served as a control group. The rates of exclusive breastfeeding and reports of decreased lactation were not significantly different in the two groups.[7]

### References

1 Erkkola R, Kanto J, Allonen H, . Excretion of methylergometrine (methylergonovine) into the human breast milk. Int J Clin Pharmacol Biopharm 1978;16:579–80.730424
2 Iwamura S, Kambegawa A. Determination of methylergometrine and dihydroergotoxine in biological fluids. J Pharmacobiodyn 1981;4:275–81.7264872
3 Vogel D, Burkhardt T, Rentsch K, . Misoprostol versus methylergometrine: Pharmacokinetics in human milk. Am J Obstet Gynecol 2004;191:2168–73.15592308
4 Nakamichi T, Yawata A, Hojo H, . Monitoring of methylergometrine in human breast milk by solid-phase extraction and high-performance liquid chromatography with fluorimetric detection. Pharmazie 2012;67:482–4.22822533
5 Nandan Wadgaonkar. Novartis Pharmaceuticals.Personal Communication to Philip Anderson:September 27, 2012.
6 ANSM Groupe de Travail Reproduction Grossesse et Allaitement Séance du 5, avril, 2013 de 13h00 B 17h00, October, 29, 2013, Document, GT252013013, Accessed, June, 20, 2014.
7 Gilad O, Merlob P, Stahl B, . Outcome of breastfed infants following post-partum methylergonovine treatment. J Matern Fetal Neonatal Med 2017;30:1569–73.27846760
8 del Pozo E, Brun del Re RB, Hinselmann M. Lack of effect of methyl-ergonovine on postpartum lactation. Am J Obstet Gynecol 1975;123:845–6.1200082
9 Perez-López FR, Delvoye P, Denayer P, . Effect of methylergobasine maleate on serum gonadotrophin and prolactin in humans. Acta Endocrinol (Copenh) 1975;79:644–57.1174274
10 Weiss G, Klein S, Shenkman L, . Effect of methylergonovine on puerperal prolactin secretion. Obstet Gynecol 1975;46:209–10.1080266
11 Jolivet A, Robyn C, Huraux-Rendu C, . Effect of ergot alkaloid derivatives on milk secretion in the immediate postpartum period. J Gynecol Obstet Biol Reprod (Paris) 1978;7:129–34.641312
12 Peters F, Lummerich M, Breckwoldt M. Inhibition of prolactin and lactation by methylergometrine hydrogenmaleate. Acta Endocrinol (Copenh) 1979;91:213–6.463447
13 del Castillo FJ, Ramírez BM, Diaz-Infante Ibarra, A. Effect of methylergovine on the secretion of prolactin in childbirth and the puerperium. Ginecol Obstet Mex 1980;48:311–6.7250712
14 González P, Gayan P, Pineda G, . Plasma prolactin in the puerperium and its relation to the use of methylergonovine maleate. Rev Chil Obstet Ginecol 1984;49:149–55.6543471
15 Arabin B, Ruttgers H, Kubli F. Effects of routine administration of methylergometrine during puerperium on involution, maternal morbidity and lactation. Geburtshilfe Frauenheilkd 1986;46:215–20.3519353

## Substance Identification

### Substance Name

Methylergonovine

### CAS Registry Number

113-42-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Ergot Alkaloids

Oxytocics